# Tremelimumab

CASRN: 745013-59-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tremelimumab during breastfeeding. Because tremelimumab is a large protein molecule with a molecular weight of about 149,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[2] The manufacturer recommends that breastfeeding be discontinued during cemiplimab therapy and for 3 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, . A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488

## Substance Identification

### Substance Name

Tremelimumab

### CAS Registry Number

745013-59-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents

Immune Checkpoint Inhibitors